# Emicizumab

CASRN: 1610943-06-0

## Drug Levels and Effects

### Summary of Use during Lactation

A low level of emicizumab was found in the milk of 2 women. The drug is likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] One infant was breastfed for 2 months starting at 4 months of age during maternal therapy with no obvious adverse reaction. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[2]

### Drug Levels

Maternal Levels. A woman with severe hemophilia A received emicizumab every 4 weeks (dose not stated, but probably 6 mg/kg) throughout pregnancy and postpartum as well as recombinant factor VIIa (NovoSeven) 90 mcg/kg every 2 hours initially with a gradually increasing dosage interval postpartum for severe bleeding. A milk sample taken at an unreported time contained 38 mg/L of emicizumab.[3]

Milk samples were collected from a woman who developed acquired hemophilia A four months after delivery. She was treated with emicizumab in a loading doses of 600 mg (6 mg/kg) and 300 mg (3 mg/kg) subcutaneously on days 3 and 4 of hospitalization, respectively, followed by a maintenance dose of 150 mg on day 10 and continued weekly thereafter. Emicizumab was first detected on day 4 of hospitalization at concentrations below the lower limit of quantification (LLOQ) of 10 mg/L. Milk concentrations increased over time and exceeded the LLOQ on day 6. By day 8, the mean concentration reached 20.1 mg/L in breastmilk. Anti-FVIII IgG and IgA were not detected in breastmilk samples.[4]

Infant Levels. A woman with severe hemophilia A was receiving emicizumab every 4 weeks (dose not stated, but probably 6 mg/kg) throughout pregnancy and postpartum as well as recombinant factor VIIa (NovoSeven) 90 mcg/kg every 2 hours initially with a gradually increasing dosage interval postpartum for severe bleeding. A serum sample taken from the infant at an unreported time contained 106 mg/L of emicizumab, probably obtained transplacentally.[3]

### Effects in Breastfed Infants

A woman who developed acquired hemophilia A four months after delivery. She was treated with emicizumab in a loading doses of 600 mg (6 mg/kg) and 300 mg (3 mg/kg) subcutaneously on days 3 and 4 of hospitalization, respectively, followed by a maintenance dose of 150 mg on day 10 and continued weekly thereafter. Her infant was exclusively breastfed for six months and demonstrated normal weight gain without failure to thrive. No signs of bleeding or thromboembolic events were observed at any time.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
2 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
3 Kharel Z, Pruthi RK, Kouides PA, et al. Transplacental transfer of emicizumab: Experience with emicizumab in a pregnant female with severe hemophilia A and an inhibitor. Blood 2023;142:5492. doi:10.1182/blood-2023-190012
4 Krooss SA, Halling T, Varnholt D, et al. Transfer of emicizumab into breast milk in postpartum acquired hemophilia A. J Thromb Haemost 2026 42413825

## Substance Identification

### Substance Name

Emicizumab

### CAS Registry Number

1610943-06-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Bispecific

Antibodies, Monoclonal, Humanized